# Cangrelor

CASRN: 163706-06-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of cangrelor during breastfeeding. Because cangrelor is 97 to 98% bound to plasma proteins, the amount in milk is likely to be low. The half-life averages only 3 to 6 minutes, further limiting infant exposure. If a mother requires cangrelor, it is not a reason to discontinue breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Cangrelor

### CAS Registry Number

163706-06-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Platelet Aggregation Inhibitors

Purinergic P2Y Receptor Antagonists